# Phenelzine

CASRN: 51-71-8

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the lack of data on use during breastfeeding, other antidepressants are preferred during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Phenelzine can elevate serum prolactin in some patients and has caused galactorrhea in nonpregnant, nonnursing patients.[1,2] The clinical relevance of these findings in nursing mothers is not known. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Coker F, Taylor D. (2010). Antidepressant-induced hyperprolactinaemia: Incidence, mechanisms and management. CNS Drugs.
2 Segal M, Heys RF. (1969). Inappropriate lactation. Br Med J.

## Substance Identification

### Substance Name

Phenelzine

### CAS Registry Number

51-71-8

### Drug Class

Breast Feeding

Lactation

Antidepressive Agents

Monoamine Oxidase Inhibitors